# Etonogestrel

CASRN: 54048-10-1

## Drug Levels and Effects

### Summary of Use during Lactation

Etonogestrel is available in the United States in a combination contraceptive vaginal ring (NuvaRing) that releases 120 mcg of etonogestrel and 15 mcg of ethinyl estradiol daily, and subcutaneous implants (Implanon, Nexplanon) that release etonogestrel at a decreasing rate over a 3-year period.

Based on the available evidence, expert opinion in the United States holds that postpartum women who are breastfeeding should not use combined hormonal contraceptives (e.g., NuvaRing) during the first 3 weeks after delivery because of concerns about increased risk for venous thromboembolism and generally should not use combined hormonal contraceptives during the fourth week postpartum because of concerns about potential effects on breastfeeding performance. Postpartum breastfeeding women with other risk factors for venous thromboembolism generally should not use combined hormonal contraceptives until 6 weeks after delivery.[1] World Health Organization guidelines are more restrictive, stating that combined oral contraceptives should not be used in nursing mothers before 42 days postpartum and the disadvantages of using the method generally outweigh the advantages between 6 weeks and 6 months postpartum.[2] A decrease in milk supply can happen over the first few days of estrogen exposure and another small study suggests that vaginal rings containing ethinyl estradiol 15 mcg daily are associated with a modest decrease in milk volume over the longer term.[3,4]

Expert opinion holds that the risks of progestin-only contraceptive products (e.g., Nexplanon) usually are acceptable for nursing mothers at any time postpartum.[2,5] A review of published data concluded that the etonogestrel implant appears to have a risk of lactation suppression of about 0.9%.[6] A meta-analysis that immediate postpartum progestin contraceptive implant insertion (etonogestrel or levonorgestrel) does not interfere with lactogenesis, and does not reduce breastfeeding continuation at three or six months.[7] Some evidence indicates that progestin-only contraceptives may offer protection against bone mineral density loss during lactation, or at least do not exacerbate it.[8-10]

### Drug Levels

Maternal Levels. Forty-two women had an etonogestrel subcutaneous implant inserted implant inserted between 28 and 56 days postpartum. Breastmilk samples were obtained at 1, 2 and 4 months after insertion. The average breastmilk concentration of etonogestrel was 178 ng/L at 1 month (n = 41), 153 ng/L at 2 months (n = 38), and 131 ng/L at 4 months (n = 38) after insertion. The authors calculated that the infants would receive an average of 19.9 ng/kg daily at 1 month, 15.1 ng/kg daily at 2 months and 10.5 ng/kg daily at 4 months after insertion. The decreasing doses were caused by both a reduced quantity in milk and a lower breastmilk intake as time passed.[11]

The manufacturer reports a study in which 38 women had an etonogestrel implant inserted during the 4^th^ to 8^th^ week postpartum. Based on the findings of this study, during the first months after insertion of etonogestrel, when maternal blood levels of etonogestrel are highest, about 100 ng of etonogestrel may be ingested by the child per day based on an average daily milk ingestion of 658 mL. Based on daily milk ingestion of 150 mL/kg, the mean daily infant etonogestrel dose one month after insertion of an etonogestrel implant is about 2.2% of the weight-adjusted maternal daily dose.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Forty-two women had an etonogestrel subcutaneous implant (Implanon) inserted between 28 and 56 days postpartum. Compared with the infants of 38 similar mothers who had a nonhormonal intrauterine device, no statistically significant difference was found in infant illnesses or growth rates between the groups, except for a statistically nonsignificant higher weight gain in the male infants, and respiratory conditions and skin disorders in the infants of women who received the implants.[6] Infants were followed up at 3 years of age; no differences in growth or psychomotor development were found.[12]

A non-blinded, randomized study of exclusively breastfeeding women compared those who received an etonogestrel implant 24-48 hours after delivery (n = 20) to those who received a 150 mg depot medroxyprogesterone acetate injection at 6 weeks postpartum (n = 20). No difference in infant weight gain was noted between the two groups.[13]

A randomized, prospective study compared the growth of infants of mothers who received an etonogestrel implant either within 48 hours (n = 50) of delivery or 6 weeks (n = 50) postpartum. Breastfeeding rates and growth of the infants were not significantly different between the groups over the first year of life.[14] A follow-up study found that infants had normal development up to 12 to 15 months.[15]

The manufacturer reports a study in which 38 women had an etonogestrel implant inserted during the 4^th^ to 8^th^ week postpartum. Adverse reactions were not observed in breastfed infants exposed to etonogestrel through breast milk.

A prospective, nonrandomized trial compared 4 contraceptives in 10 women each to assess their effect on milk production. One of the following were begun on day 42 postpartum as chosen by the mother: combined ethinyl estradiol 30 mcg plus levonorgestrel 150 mcg (Microvlar), etonogestrel implant (Implanon), levonorgestrel intrauterine system (Myrena), or a copper IUD (Optima). Milk intake was measured using deuterium oxide given to the mother and measured in the infants' saliva as well as numbers of wet diapers per day. Infants were also weighed and measured to assess growth. No differences in milk intake or infant growth were observed between the methods from days 42 through 63.[16]

A small study randomized postpartum women to either an etonogestrel implant (Implanon) within 48 hours postpartum (n = 12) or no contraception for the first 6 weeks postpartum (n = 12). Breastmilk intake was measured in the first 48 hours postpartum and on day 29 postpartum. No difference in milk intake was found between the two groups and no difference was seen in the weight gain of newborns during the follow-up period.[17]

### Effects on Lactation and Breastmilk

Forty-two women had an etonogestrel subcutaneous implant (Implanon) inserted between 28 and 56 days postpartum. Compared with 38 similar mothers who had a nonhormonal intrauterine device, no difference was found in milk volume, or in milk lactose, protein or fat content.[11] No difference was seen between the two groups in duration of lactation, averaging 421 days in the Implanon group and 423 days in the IUD group.[12]

The manufacturer reports a study in which 38 women had an etonogestrel implant inserted during the 4^th^ to 8^th^ week postpartum. No adverse effects on the production or quality of breast milk were detected.

A non-blinded, randomized study of exclusively breastfeeding women compared those who received an etonogestrel implant 24 to 48 hours after delivery (n = 20) to those who received a 150 mg depot medroxyprogesterone acetate injection at 6 weeks postpartum (n = 20). The rates of exclusive breastfeeding were similar between the groups at 6 and 12 weeks postpartum.[13]

A randomized, controlled study compared etonogestrel implant insertion at 1 to 3 days postpartum (n = 35) to insertion at 4 to 8 weeks postpartum (n = 34). Several outcome parameters were measured: time to lactogenesis II, prevalence of lactation failure, use of formula supplementation and milk composition at 6 weeks postpartum. No differences were found in any of the outcomes between the two groups.[18]

A woman was breastfeeding a newborn successfully with good infant growth. On day 39 postpartum, an etonogestrel implant (Nexplanon) was inserted. By day 70 postpartum, the mother reported a decrease in milk supply, and her infant had lost weight, going from the 44th percentile to the 6th percentile for growth. Five weeks later, the mother had transitioned completely to formula feeding. The authors requested reports on etonogestrel from the FDA and found a similar case of loss of milk supply. From a review of 4 published studies, the authors estimated that there is about a 0.9% (range 0.2 to 5.4%) chance of lactation suppression with the etonogestrel implant.[6]

A randomized, nonblinded trial compared the insertion of an etonogestrel contraceptive implant (brand not specified) in postpartum women 14 to 24 years old either before discharge or at 6 weeks postpartum. Breastfeeding rates at 3 and 6 months postpartum were slightly higher in the women who had immediate placement of the insert, but the differences were not statistically significant.[19]

A randomized, prospective study compared the growth of infants of mothers who received an etonogestrel implant either within 48 hours (n = 50) of delivery or 6 weeks (n = 50) postpartum. Breastfeeding rates were not significantly different between the groups over the first year of life.[14]

A study in Malawi compared the breastfeeding rates between women who received an etonogestrel (n = 28) or levonorgestrel (n = 112) implant immediately postpartum. Mothers chose the method and were followed for 2 years postpartum. Most women breastfed for 2 years. No difference was seen in the exclusive breastfeeding rate at 6 months between the groups nor in the continuation of breastfeeding to 2 years.[20]

A study of women who expressed a desire to breastfeed randomized them to receive a progestin implant (presumably etonogestrel) either in the delivery room or at 24 to 48 hours after delivery. The time to lactogenesis II was not significantly different between the two groups.[21]

A small, nonrandomized, prospective pilot study compared the time to secretory activation in women who received an etonogestrel implant (Nexplanon; n = 8) to those receiving no contraception (n = 24). Women who received the etonogestrel implant had a delay in secretory activation compared to those who did not, as measured by biochemical markers.[22]

A noninferiority study randomized postpartum women to insertion of an etonogestrel implant at either 0 to 2 hours (n = 35) or 24 to 48 hours (n = 34) post-delivery. No significant difference was found between the two groups in the time to lactogenesis II.[23]

A study randomized postpartum women at high risk for low milk supply to receive the etonogestrel implant either within 30 minutes of placental delivery, 24 to 72 hours postpartum, or 6 or more weeks postpartum. There was no significant difference in time to lactogenesis II between the groups, with an average time of 62 hours. Duration and exclusivity of breastfeeding, satisfaction with the implant, and reports of heavy or irregular bleeding were similar among all groups.[24]

A woman reported persistent galactorrhea after implantation of Nexplanon 2 months after delivery and breastfeeding her infant. The galactorrhea persisted for 2 years until the Nexplanon implant was removed. Her galactorrhea was improved 1 and 7 months after removal.[25]

A study at two US medical centers compared insertion of etonogestrel implants withing the first 24 hours after delivery or at least 2 weeks after delivery in a noninferiority trial. The breastfeeding rate (any breastfeeding) at 8 weeks was 77% for the immediate group (n = 62) and 81% in the delayed placement group in the delayed group (n=53). Exclusive breastfeeding rates were also similar between the groups: 56% (immediate) vs 53% (delayed) at 2 weeks postpartum and 23% (immediate) and 17% (delayed) at 24 weeks postpartum. Any breastfeeding was also similar at 24 weeks: 53% (immediate) and 50% (delayed).[26] However, The results have been questioned on statistical grounds and for being underpowered.[27]

In a small study on breastfeeding women who were 6 weeks to 6 months postpartum, participants completed a questionnaire on their breastfeeding. Women who were receiving contraception with a vaginal ring containing ethinyl estradiol 15 mcg and etonogestrel 120 mcg daily (NuvaRing) were compared to women who were receiving an oral contraceptive containing either ethinyl estradiol 20 mcg plus desogestrel 150 mcg daily, desogestrel 75 mcg daily alone, and breastfeeding women taking no hormonal contraception. The vaginal ring was associated with up to 20% reduced milk volume when comparing two timepoints before and after combines hormonal contraception introduction. The vaginal rings, but not oral contraceptives, were correlated with impairment in 5 of 12 breastfeeding variables: breastfeeding interval, self-expressed milk volume, use of milk substitutes, number of night-feedings, and number of full diapers.[4]

### Alternate Drugs to Consider

Intrauterine Copper Contraceptive, Oral Levonorgestrel, Intrauterine Levonorgestrel, Levonorgestrel Implant, Medroxyprogesterone Acetate, Norethindrone, Progesterone

### References

1 Nguyen AT, Curtis KM, Tepper NK, et al. U.S. Medical Eligibility Criteria for Contraceptive Use, 2024. MMWR Recomm Rep 2024;73:1–126.39106314
2 World Health Organization. Medical Eligibility Criteria For Contraceptive Use: Fifth Ed. 2015https://www.who.int/publications/i/item/9789241549158
3 Moses-Kolko EL, Berga SL, Kalro B, et al. Transdermal estradiol for postpartum depression: A promising treatment option. Clin Obstet Gynecol 2009;52:516–29.19661765
4 Segev L, Weitzman G, Hijazi B, et al. Combined hormonal contraception with low-dose ethinylestradiol is associated with modest reduction of breast milk volume when administered vaginally, but not orally. Breastfeed Med 2026;21:351–8.42136078
5 Vricella LK, Gawron LM, Louis JM. Society for Maternal-Fetal Medicine (SMFM) Consult Series #48: Immediate postpartum long-acting reversible contraception for women at high-risk for medical complications. Am J Obstet Gynecol 2019;220:B2–B12.30738885
6 Stuebe AM, Bryant AG, Lewis R, et al. Association of etonogestrel-releasing contraceptive implant with reduced weight gain in an exclusively breastfed infant: Report and literature review. Breastfeed Med 2016;11:203–6.27032034
7 Lemos MJ, Fonseca Queiroz L, de Oliveira Ortiz I, et al. Immediate versus delayed postpartum contraceptive implant on lactogenesis and breastfeeding: A systematic review and meta-analysis. Eur J Contracept Reprod Health Care 2026;31:129–39.41404833
8 Caird LE, Reid-Thomas V, Hannan WJ, et al. Oral progestogen-only contraception may protect against loss of bone mass in breast-feeding women. Clin Endocrinol (Oxf) 1994;41:739–45.7889609
9 Díaz S, Reyes MV, Zepeda A, et al. Norplant((R)) implants and progesterone vaginal rings do not affect maternal bone turnover and density during lactation and after weaning. Hum Reprod 1999;14:2499–505.10527977
10 Costa ML, Cecatti JG, Krupa FG, et al. Progestin-only contraception prevents bone loss in postpartum breastfeeding women. Contraception 2012;85:374–80.22036473
11 Reinprayoon D, Taneepanichskul S, Bunyavejchevin S, et al. Effects of the etonogestrel-releasing contraceptive implant (Implanon) on parameters of breastfeeding compared to those of an intrauterine device. Contraception 2000;62:239–46.11172794
12 Taneepanichskul S, Reinprayoon D, Thaithumyanon P, et al. Effects of the etonogestrel-releasing implant Implanon(R) and a nonmedicated intrauterine device on the growth of breast-fed infants. Contraception 2006;73:368–71.16531169
13 Brito MB, Ferriani RA, Quintana SM, et al. Safety of the etonogestrel-releasing implant during the immediate postpartum period: A pilot study. Contraception 2009;80:519–26.19913145
14 Carmo LS, Braga GC, Ferriani RA, et al. Timing of etonogestrel-releasing implants and growth of breastfed infants: A randomized controlled trial. Obstet Gynecol 2017;130:100–7.28594758
15 de Nadai MN, Martins Linhares MB, de Lima Rodrigues Sisdeli JC, et al. Effects of the immediate postpartum insertion of the etonogestrel implant on the development of breastfed infants: Results from a randomized controlled trial. Int J Gynaecol Obstet 2025;171:1223–30.40488538
16 Bahamondes L, Bahamondes MV, Modesto W, et al. Effect of hormonal contraceptives during breastfeeding on infant's milk ingestion and growth. Fertil Steril 2013;100:445–50.23623474
17 Braga GC, Ferriolli E, Quintana SM, et al. Immediate post-partum initiation of etonogestrel-releasing implant: A randomized controlled trial on breastfeeding impact. Contraception 2015;92:536–42.26209863
18 Gurtcheff SE, Turok DK, Stoddard G, et al. Lactogenesis after early postpartum use of the contraceptive implant: A randomized controlled trial. Obstet Gynecol 2011;117:1114–21.21508750
19 Bryant AG, Bauer AE, Stuart GS, et al. Etonogestrel-releasing contraceptive implant for postpartum adolescents: A randomized controlled trial. J Pediatr Adolesc Gynecol 2017;30:389–94.27561981
20 Krashin JW, Lemani C, Nkambule J, et al. A comparison of breastfeeding exclusivity and duration rates between immediate postpartum levonorgestrel versus etonogestrel implant users: A prospective cohort study. Breastfeed Med 2019;14:69–76.30508390
21 Shaw KA, Lerma K, Reyes G, et al. Effect of delivery room postpartum contraceptive implant insertion on initiation of breastfeeding. Obstet Gynecol 2020;135 (Suppl 1)doi:10.1097/01.AOG.0000664288.83616.6e
22 Nilsson W, Myers E, Buta E, et al. Etonogestrel implant in the postpartum period and its impact on biochemical markers in secretory activation: A pilot study. J Hum Lact 2023;39:325–32.35466776
23 Henkel A, Lerma K, Reyes G, et al. Lactogenesis and breastfeeding after immediate versus delayed birth-hospitalization insertion of etonogestrel contraceptive implant: A non-inferiority trial. Am J Obstet Gynecol 2023;228:55.e1–.e9.
24 Levi EE, Avila K, Wu H. Immediate postpartum contraceptive implant placement and breastfeeding success in postpartum people at risk for low milk supply: A randomized non-inferiority trial. Contraception 2025;144:110806.39730026
25 Huq A, Ahmad U. A rare case of Nexplanon implant associated galactorrhea. J Gen Intern Med 2023;38:S419. doi:10.1007/s11606-023-08226-z
26 Krashin JW, Rivera-Montalvo M, Leeman L, et al. Breastfeeding after immediate versus delayed postpartum contraceptive implant placement: A non-inferiority randomized controlled trial. Am J Obstet Gynecol 2025;233:292.e1–.e9.
27 Li S, Hao X, Li S. Immediate postpartum etonogestrel implant placement and breastfeeding-can we safely abandon the 24-hour rule? . Am J Obstet Gynecol 2025;234:e216.41354203

## Substance Identification

### Substance Name

Etonogestrel

### CAS Registry Number

54048-10-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contraceptive Agents, Female